# Amdinocillin

CASRN: 32886-97-8

## Drug Levels and Effects

### Summary of Use during Lactation

Amdinocillin (pivmecillinam; the pivaloyl ester of mecillinam) is not commercially available in the United States, but is marketed internationally. Limited information indicates that amdinocillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Monitor the breastfed infant for diarrhea and thrush.

### Drug Levels

Maternal Levels. Four women who were 4 or 6 days postpartum were given a single 100 mg dose of amdinocillin. The drug was not detectable in breastmilk 1 or 3 hours after the dose, although the sensitivity of the assay is unknown.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Seiga K, Minagawa M, Yamaji K, et al. (1977). Studies on pivmecillinam. Chemotherapy (Tokyo).

## Substance Identification

### Substance Name

Amdinocillin

### CAS Registry Number

32886-97-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Urinary

Anti-Bacterial Agents

Beta-Lactams

Penicillins